# Ravulizumab

CASRN: 1803171-55-2

## Drug Levels and Effects

### Summary of Use during Lactation

Several have been breastfed without harm by mothers taking ravulizumab. The milk concentration was very low in one patient, consistent with it being a large protein molecule with a molecular weight of about 148,000 Da. Absorption is unlikely because it is probably partially destroyed in the infant's gastrointestinal tract. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[1] The manufacturer recommends that breastfeeding be discontinued during ravulizumab therapy and for 8 months after the final dose.

### Drug Levels

Maternal Levels. A multicenter, retrospective study identified one mother receiving ravulizumab during pregnancy and postpartum for paroxysmal nocturnal hemoglobinuria. Three days after delivery ravulizumab concentration in breastmilk was 1.9 mg/L in one patient, although the details of the dosage and timing of the previous dose were not provided. The milk level was much lower than the cord blood or maternal serum concentrations.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A single-center, retrospective review of 19 women who received ravulizumab during pregnancy and postpartum revealed 16 mothers who breastfed during ravulizumab therapy. After a median follow-up of 16.2 months (IQR 4.4 to 40.1 months), no developmental abnormalities or severe infectious complications were observed in the children.[2]

A mother taking ravulizumab was switched to eculizumab during pregnancy. She delivered a baby by cesarean section. At 3 weeks postpartum, she switched back to ravulizumab (dose not stated). The boy was fully breastfed and appeared well during the routine check-ups.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Eculizumab

### References

1 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808
2 Höchsmann B, Gerber GF, Leopold W, et al. Ravulizumab for treatment of paroxysmal nocturnal hemoglobinuria during pregnancy. Blood Adv 2026;10:3067–74.41610317
3 Füreder W, Granser S, Repa A, et al. Ravulizumab exposure in early pregnancy. Ann Hematol 2025;104:6081–4.41081867

## Substance Identification

### Substance Name

Ravulizumab

### CAS Registry Number

1803171-55-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal